# Desloratadine

CASRN: 100643-71-8

## Drug Levels and Effects

### Summary of Use during Lactation

Because of its expected low milk levels and lack of sedation and anticholinergic effects, maternal use of desloratadine is unlikely to affect a breastfed infant or milk production. Desloratadine might have a negative effect on lactation in combination with a sympathomimetic agent such as pseudoephedrine.

### Drug Levels

Desloratadine is the active metabolite of loratadine and is marketed separately as a drug product.

Maternal Levels. Milk levels have not been measured after desloratadine administration. However, after a single oral dose of 40 mg of its parent compound loratadine in 6 women, average desloratadine peak milk levels of 16 mcg/L (range 9 to 29.6 mcg/L) were measured. The total amount excreted in milk over 48 hours was 6 mcg (range 3.7 to 11.6 mcg). However, the loratadine dose was 10 times the recommended dose of desloratadine of 5 mg, assuming 100% conversion of loratadine to desloratadine and adjusting for the differences in molecular weight. The calculated maximum expected doses of desloratadine in milk was 0.42% of the maternal weight-adjusted dose of loratadine after the 40 mg loratadine dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Antihistamines in relatively high doses given by injection can decrease basal serum prolactin in nonlactating women and in early postpartum women.[2,3] However, suckling-induced prolactin secretion is not affected by antihistamine pretreatment of postpartum mothers.[2] Whether lower oral doses of antihistamines have the same effect on serum prolactin or whether the effects on prolactin have any consequences on breastfeeding success have not been studied. The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Cetirizine, Fexofenadine, Levocetirizine, Loratadine

### References

1 Hilbert J, Radwanski E, Affine MB, et al. Excretion of loratadine in human breast milk. J Clin Pharmacol 1988;28:234-9.2966185
2 Messinis IE, Souvatzoglou A, Fais N, et al. Histamine H1 receptor participation in the control of prolactin secretion in postpartum. J Endocrinol Invest 1985;8:143-6.3928731
3 Pontiroli AE, De Castro e Silva E, Mazzoleni F, et al. The effect of histamine and H1 and H2 receptors on prolactin and luteinizing hormone release in humans: Sex differences and the role of stress. J Clin Endocrinol Metab 1981;52:924-8.7228996

## Substance Identification

### Substance Name

Desloratadine

### CAS Registry Number

100643-71-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihistamines

Antipruritics

Nonsedating Antihistamines